# Naloxone

CASRN: 465-65-6

## Drug Levels and Effects

### Summary of Use during Lactation

Naloxone is excreted into milk in very small amounts and is not detectable in the plasma of breastfed infants because of its very poor oral bioavailability. Routine use of naloxone in combination products is of no concern during breastfeeding. However, if naloxone is required by the mother for an opioid overdose, she should withhold nursing until the opioid is out of her system.

### Drug Levels

Maternal Levels. Four women receiving buprenorphine and naloxone combination therapy as sublingual filmstrips for opioid use disorder provided milk samples at 2.5 hours after ingestion of the drug. Three participants provided samples on Days 2, 3, 4, 14, and 30; one participant provided samples only until Day 4. Maternal buprenorphine-naloxone doses ranged from 12 mg/3 mg to 20 mg/5 mg. Naloxone was detected only on day 14 in one participant at a concentration of 1.3 mcg/L. Naloxone glucuronide was detected in only some milk samples in average concentrations ranging from 3.15 to 5.7 mcg/L. [1]

Infant Levels. Women receiving buprenorphine and naloxone combination in doses ranging from 12 mg/3 mg to 20 mg/5 mg therapy as sublingual filmstrips for opioid use disorder breastfed their infants, one exclusively and three partially. Plasma was obtained from 3 infants via a heel stick on day 14. Naloxone and naloxone glucuronide were either not detected or detected at concentrations below the limit of quantification in all infant plasma samples at day 14.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In contrast to its effect in some animal species, naloxone does not affect suckling-induced secretion of oxytocin or prolactin in postpartum women.[2,3]

### Alternate Drugs to Consider

Naltrexone

### References

1 Jansson LM, McConnell K, Velez M, et al. Buprenorphine-naloxone maintenance and lactation. J Hum Lact 2024;40:113-9.38018534
2 Cholst IN, Wardlaw SL, Newman CB, Frantz AG. Prolactin response to breast stimulation in lactating women is not mediated by endogenous opioids. Am J Obstet Gynecol 1984;150:558-61.6496587
3 Johnson MR, Andrews MA, Seckl JR, Lightman SL. Effect of naloxone on neurohypophyseal peptide responses to breast feeding and breast stimulation in man. Clin Endocrinol (Oxf) 1990;33:81-6.2401100

## Substance Identification

### Substance Name

Naloxone

### CAS Registry Number

465-65-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Narcotic Antagonists